# Ceftizoxime

CASRN: 68401-81-0

## Drug Levels and Effects

### Summary of Use during Lactation

Ceftizoxime is no longer marketed in the US. Limited information indicates that ceftizoxime produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with cephalosporins, but these effects have not been adequately evaluated. Ceftizoxime is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. After a single 1 gram intravenous dose of ceftizoxime in 2 women, milk levels ranged from 0.31 to 0.43 mg/L from 2 to 8 hours after the dose. The peak milk level occurred at 2 hours after the dose in one and 6 hours after the dose in the other.[1]

Five women were given 1 gram of ceftizoxime intravenously. Average peak milk levels of 0.39 mg/L occurred 3 hours after the dose, although individuals had peak levels ranging from 0.31 mg/L at 3 hours after the dose to 0.83 mg/L at 6 hours after the dose. Four of the women had undetectable milk levels by 6 hours after the dose.[2]

In six women given 1 gram of ceftizoxime intravenously, average milk levels were 0.25 mg/L 1 hour after the dose.[3]

After a single 1 gram intravenous dose in 2 women, ceftizoxime milk levels were measurable only 4 hours after the dose and averaged 0.1 mg/L.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Motomura R, Kohno M, Mori H, et al. Basic and clinical studies of ceftizoxime in obstetrics and gynecology. Chemotherapy (Tokyo) 1980;28 (Suppl 5):888-99.
2 Takase Z, Inoue K, Shirafuji H, et al. Clinical and laboratory studies on ceftizoxime (CZX) in the field of obstetrics and gynecology. Chemotherapy (Tokyo) 1980;28 (Suppl. 5):863-73.
3 Gerding DN, Peterson LR. Comparative tissue and extravascular fluid concentrations of ceftizoxime. J Antimicrob Chemother 1982;10 (Suppl C):105-16.6295995
4 Matsuda S. Transfer of antibiotics into maternal milk. Biol Res Pregnancy Perinatol 1984;5:57-60.6743732

## Substance Identification

### Substance Name

Ceftizoxime

### CAS Registry Number

68401-81-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Cephalosporins